# Malathion

CASRN: 121-75-5

## Drug Levels and Effects

### Summary of Use during Lactation

Malathion appears to be poorly absorbed after topical application, so it is not likely to reach the breastmilk in large amounts. Some guidelines consider it a second-choice alternative for the treatment of scabies in nursing mothers.[1]

### Drug Levels

The manufacturer reports that 8% of a topically applied solution of malathion (concentration unspecified) in an acetone vehicle is absorbed through human skin. However, the extent of absorption from commercial 0.5% malathion lotion is not known.

Maternal Levels. Nine breastmilk samples were analyzed from women who lived in an area of California that had been sprayed in 1981 with malathion from 4 to 14 times during their pregnancy and lactation. Malathion was undetectable (<5 mcg/L) in all of the samples. Any exposure of the women would probably have been via inhalation or direct ingestion.[2]

Twelve donors from Bhopal, India provided hindmilk samples to monitor for malathion. The mean malathion level in the samples was 0.043 mg/L (range 0 to 0.086 mg/L). The calculated daily intake by breastfed infants was 40% higher than the World Health Organization recommended average daily intake. The source of malathion was thought to be from contaminated food crops that had been harvested before the recommended waiting time after spraying.[3]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Ivermectin, Permethrin, Pyrethrins

### References

1 Morris G, Haddow L, Sashidharan PN, . British Association for Sexual Health and HIV National Guideline on the Management of Scabies in adults 2025. Int J STD AIDS 2025;36:516–32.40103364
2 Lönnerdal B, Asquith MT. Malathion not detected in breast milk of women living in aerial spraying areas. N Engl J Med 1982;307:439.
3 Sanghi R, Pillai MK, Jayalekshmi TR, . Organochlorine and organophosphorus pesticide residues in breast milk from Bhopal, Madhya Pradesh, India. Hum Exp Toxicol 2003;22:73–6.12693830

## Substance Identification

### Substance Name

Malathion

### CAS Registry Number

121-75-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Antiparasitic Agents

Insecticides